# Idarucizumab

CASRN: 1362509-93-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of idarucizumab during breastfeeding. Because it is a large protein molecule with a molecular weight of about 48,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] Until more data become available, idarucizumab should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488

## Substance Identification

### Substance Name

Idarucizumab

### CAS Registry Number

1362509-93-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Immunoglobulin Fragments

Antibodies, Monoclonal